# Doxepin

CASRN: 1668-19-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of its sedating potential, active metabolite, presence in infant serum, two reports of adverse effects in breastfed infants, and only one report of use without apparent adverse reactions, doxepin is a poor choice and other agents are preferred, especially while nursing a newborn or preterm infant. A safety scoring system finds doxepin to be not recommended during breastfeeding.[1]

Maternal use of topical doxepin cream is unlikely to pose a problem for a breastfed infant as long as it is applied away from the breasts so that the infant cannot ingest the drug directly.

### Drug Levels

Doxepin is metabolized to N-desmethyldoxepin which has antidepressant activity equal to that of doxepin.[2]

Maternal Levels. In one patient taking doxepin 25 mg three times daily, milk doxepin levels ranged from 7 to 29 mcg/L at various times throughout the day, with peaks occurring at about 4 to 5 hours after the dose. N-desmethyldoxepin levels ranged from trace to 11 mcg/L.[3]

A mother who was taking 150 mg daily at bedtime, had milk doxepin and metabolite levels measured 8 times before and after feeding her infant over a 92-day postpartum period at about 18 hours after her dose. Her doxepin plus N-desmethyldoxepin milk levels averaged 141 mcg/L prefeed and 214 mcg/L postfeed. The authors estimated that the infant received about 2.2% of the maternal weight-adjusted dosage.[4]

A mother who was taking doxepin 35 mg daily had breastmilk doxepin and N-desmethyldoxepin measured 3 times 11 to 13 days postpartum from 13 to 15 hours after the dose. The combined milk levels were 60, 100 and 100 mcg/L.[5]

Infant Levels. An 8-week-old exclusively breastfed infant whose mother was taking doxepin 25 mg three times daily had serum levels of N-desmethyldoxepin of 58 and 66 mcg/L on 2 occasions that were almost as high as maternal serum. The infant's doxepin serum level was 3 mcg/L.[3]

An infant whose mother was taking 150 mg of doxepin a bedtime daily had an undetectable (<5 mcg/L) serum doxepin level and 15 mcg/L of N-desmethyldoxepin at 43 days of age, which was 15% of the mother's serum N-desmethyldoxepin level.[4]

An 11-day-old infant whose mother was taking 35 mg daily of doxepin had combined doxepin plus N-desmethyldoxepin plasma levels that were undetectable (<40 mcg/L). Doxepin concentration was about 10 mcg/L and N-desmethyldoxepin was undetectable (<10 mcg/L) 2 hours after feeding.[5]

### Effects in Breastfed Infants

One infant was breastfed (extent not stated) over a 2-month period during maternal use of doxepin 150 mg at bedtime, beginning at 30 days postpartum. The infant experienced no apparent adverse reactions.[4]

One infant had an adverse reaction that was probably caused by doxepin in breastmilk. An 8-week-old breastfed infant was found pale, limp, somnolent and almost not breathing 4 days after the maternal dosage had been increased from 10 mg daily to 25 mg three times daily. The infant returned to normal 24 hours after discontinuing breastfeeding.[3]

A 9-day-old breastfed infant had poor sucking and swallowing, hypotonia, vomiting, and weight loss. The reaction was probably caused by doxepin in breastmilk. The infant's mother was taking 35 mg of doxepin at bedtime daily.[5]

### Effects on Lactation and Breastmilk

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[6] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[7] None of the mothers were taking doxepin.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[8]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Weissman AM, Levy BT, Hartz AJ, et al. Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
3 Matheson I, Pande H, Alertsen AR. Respiratory depression caused by N-desmethyldoxepin in breast milk. Lancet 1985;326:1124.2865592
4 Kemp J, Ilett KF, Booth J, et al. Excretion of doxepin and N-desmethyldoxepin in human milk. Br J Clin Pharmacol 1985;20:497-9.4074620
5 Frey OR, Scheidt P, von Brenndorff AI. Adverse effects in a newborn infant breast-fed by a mother treated with doxepin. Ann Pharmacother 1999;33:690-3.10410181
6 Venkatesh KK, Castro VM, Perlis RH, et al. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
7 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
8 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Doxepin

### CAS Registry Number

1668-19-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic